# Glecaprevir

CASRN: 1365970-03-1

## Drug Levels and Effects

### Summary of Use during Lactation

Glecaprevir has not been studied in nursing mothers being treated for hepatitis C infection. Because it is 97.5% bound to maternal plasma proteins, amounts in breastmilk are likely to be very low.

Hepatitis C is not transmitted through breastmilk and breastmilk has been shown to inactivate hepatitis C virus (HCV).[1–4] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[1,4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

### References

1 Cottrell EB, Chou R, Wasson N, . Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
2 Pfaender S, Heyden J, Friesland M, . Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
3 Tovo PA, Calitri C, Scolfaro C, . Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
4 Workowski KA, Bachmann LH, Chan PA, . Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.

## Substance Identification

### Substance Name

Glecaprevir

### CAS Registry Number

1365970-03-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Protease Inhibitors